# Pegaptanib

CASRN: 222716-86-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of pegaptanib during breastfeeding. Pegaptanib inhibits vascular endothelial growth factor (VEGF). Since VEGF is present in human milk and is thought to help in maturation of the infant’s gastrointestinal tract, concern has been raised about the maternal use of VEGF inhibitors during breastfeeding. Note that the typical alternative to breastmilk is infant formula, which contains no VEGF. Until more data are available, pegaptanib should only be used with careful infant monitoring during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Pegaptanib

### CAS Registry Number

222716-86-1

### Drug Class

Breast Feeding

Lactation

Aptamers, Nucleotide